# Rubidium Chloride Rb 82

CASRN: 132486-03-4

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of rubidium chloride Rb 82 as a diagnostic agent. No information is available on the use of rubidium chloride Rb 82 during breastfeeding. The manufacturer recommends withholding breastfeeding for 1 hour after a diagnostic dose of rubidium chloride Rb 82.This length of time is greater than 10 half-lives of the radioisotope, so the nursing infant should not be exposed to radiation if this guideline is followed. The mother can nurse just before administration of the radiopharmaceutical. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[1,2] Other authorities state that no discontinuation of breastfeeding is necessary.[3]

### Drug Levels

Rb 82 decays by positron emission with a physical half-life of 1.27 minutes.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Burkhart M, Cockerham A, Cook J, et al. NUREG-1556, Volume 9, Revision 3. Consolidated guidance about materials licenses. Program-specific guidance about medical use licenses. US Nuclear Regulatory Commission Office of Nuclear Material Safety and Safeguards 2019. http://www.nrc.gov/reading-rm/doc-collections/nuregs/staff/sr1556/v9/r2/
2 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
3 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Rubidium Chloride Rb 82

### CAS Registry Number

132486-03-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Rubidium Radioisotopes

Diagnostic Agents